# Topiramate

CASRN: 97240-79-4

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal doses of topiramate up to 200 mg daily produce low levels in infant serum. Sedation and diarrhea have been reported occasionally in breastfed infants, but most infants tolerate the drug in milk well. In a few infants, no long-term adverse effects on growth and development have been seen. Monitor the infant for diarrhea, drowsiness, irritability, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants and when using combinations of anticonvulsant or psychotropic drugs.

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. Three women were taking oral topiramate daily. One taking 150 mg daily had an average milk level of 2.3 mg/L on day 24 postpartum. A mother taking 200 mg daily had average milk levels of 4.8 mg/L on day 20 postpartum and 4.6 mg/L on day 97 postpartum. The third woman who was taking 200 mg daily had average milk level 610 mcg/L on day 14 postpartum and 1.2 mg/L on day 27 postpartum. The authors estimated that the infants received doses between 0.1 and 0.7 mg/kg daily, which was between 3 and 23% of the mother’s weight-adjusted dose.[1]

A woman was taking 175 mg of topiramate daily. On day 12 postpartum, her dose was reduced to 150 mg daily and 4 hours after the dose, her milk topiramate concentration was 3.1 mg/L.[2]

A nursing mother was taking 100 mg of topiramate daily. Topiramate was detected in breastmilk at a concentration of 5.3 mg/L at an unspecified time with respect to the dose. The authors estimated that the infant might have received 35% of the maternal weight-adjusted dosage, although their calculation method is unclear.[3] Using the milk level of 5.3 mg/L, the infant would have received 56% of the maternal weight-adjusted dosage.

Twenty-two women taking topiramate during pregnancy and postpartum had measurements of topiramate in colostrum taken on day 3 or 4 postpartum for routine monitoring. Colostrum topiramate levels averaged 3.5 mg/L. Another 5 mothers had milk samples taken between day 7 and 30 (mean 16 days) postpartum. Their milk levels averaged 5.9 mg/L.[4]

Infant Levels. Three infants were breastfed from birth while their mothers were taking oral topiramate for epilepsy. Serum levels in a 24-day-old infant whose mother was taking 150 mg daily were about 475 mcg/L. Another infant whose mother was taking 200 mg daily had an average serum level of 594 mcg/L at 20 days of age and 713 mcg/L at 97 days of age. A third infant whose mother was taking 200 mg daily had undetectable (<305 mcg/L) serum levels at 14 and 27 days of age. Overall, their plasma levels were about 10 to 20% of maternal plasma levels.[1] In a preliminary report that added 3 new infants to the original 3 reported had consistent findings. Five of 6 infants had detectable (>305 mcg/L) serum concentrations, but none had quantifiable (>949 mcg/L) serum topiramate concentrations.[5]

A woman was taking 175 mg of topiramate daily. On day 26 postpartum, her breastfed infant had a serum level of 0.8 mg/L at 3 hours after a dose, which was 15% of the mother’s simultaneous serum level.[2]

In a multicenter study of nursing mother-infant pairs, 2 infants had blood samples taken at about the same time as maternal blood samples. Neither of the infants had blood levels of topiramate above the lower limit of quantification (1.6 mg/L). The authors estimated the average infant topiramate serum concentration to be 0.8 mg/L, assuming unquantifiable serum concentrations to be 50% of the lower limit of quantification. Median infant blood levels were 17.2% (range 12.4 to 22%) of their mothers’ blood levels.[6]

Nineteen infants whose mothers were taking topiramate during pregnancy and postpartum had measurements of topiramate in serum taken on day 3 or 4 postpartum for routine monitoring. The average serum concentration was 1.1 mg/L. Another 6 infants had serum topiramate levels taken between day 7 and 30 (mean 16 days) postpartum. Their serum levels averaged 2.2 mg/L. Infant serum levels averaged 51% of simultaneous maternal serum levels.[4]

### Effects in Breastfed Infants

No adverse effects were observed in 3 infants who were breastfed from birth and observed for at least 24, 27 and 97 days.[1] The authors subsequently reported 3 additional breastfed infants who also had no adverse effects.[5]

An exclusively breastfed infant whose mother was taking topiramate 300 mg, levetiracetam 2 grams, and valproate 1.8 grams daily during pregnancy and lactation appeared healthy to the investigators throughout the 6- to 8-week study period.[7]

One woman breastfed her infant for 13 months while she was taking topiramate for epilepsy. She took a daily dosage of 150 to 175 mg for the first 6 months, then 200 mg daily. At 1 year of age, the infant was developing normally and both parents stated that no side effects such as tiredness had been observed in the infant.[2]

A woman who took topiramate 300 mg daily throughout pregnancy delivered a normal, healthy infant. She reportedly breastfed her infant exclusively for 8 months at which time no adverse drug effects or neurodevelopmental delay were noted by the infant’s pediatrician.[8]

The breastfed infant of a mother who was taking 100 mg of topiramate daily developed watery, foamy stools with 8 to 10 bowel movements daily at 40 days of age. The infant’s rate of weight gain also declined. Topiramate was detected in breastmilk at a high concentration. Two weeks later, breastfeeding was discontinued. Within 24 hours, the stool frequency declined to 2 to 3 times daily, more solid and the color and odor normalized.[3] Topiramate was the probable cause of the diarrhea in the infant.

A review of 10 years of reports to the European adverse drug reaction database EudraVigilance found 4 unspecified serious adverse reactions reported in breastfed infants associated with topiramate. Further details of the cases were not reported.[9]

A mother was taking topiramate, hydroxychloroquine, methyl prednisolone and enoxaparin. She reported that her infant of 0.1 months of age who was 25% breastfed experienced vomiting. The reaction was rated as possible or probable, but mild.[10]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Migraine Prophylaxis) Divalproex, Erenumab, Metoprolol, Nortriptyline, Propranolol, Rimegepant, Valproic Acid; (Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Öhman I, Vitols S, Luef G, . Topiramate kinetics during delivery, lactation, and in the neonate: Preliminary observations. Epilepsia 2002;43:1157–60.12366729
2 Fröscher W, Jürges U. Topiramate used during breast feeding. Aktuel Neurol 2006;33:215–7.
3 Westergren T, Hjelmeland K, Kristoffersen B, . Probable topiramate-induced diarrhea in a 2-month-old breast-fed child - A case report. Epilepsy Behav Case Rep 2014;2:22–3.25667861
4 Kacirova I, Grundmann M, Brozmanova H, . Monitoring topiramate concentrations at delivery and during lactation. Biomed Pharmacother 2021;138:111446.33676308
5 Öhman I, Luef G, Tomson T. Topiramate kinetics during lactation. Epilepsia 2007;48 (Suppl. 7):156–7. doi:10.1111/j.1528-1167.2006.01370_8.x
6 Birnbaum AK, Meador KJ, Karanam A, . Antiepileptic drug exposure in infants of breastfeeding mothers with epilepsy. JAMA Neurol 2020;77:441–50.31886825
7 Johannessen SI, Helde G, Brodtkorb E. Levetiracetam concentrations in serum and in breast milk at birth and during lactation. Epilepsia 2005;46:775–7.15857447
8 Gentile S. Topiramate in pregnancy and breastfeeding. Clin Drug Investig 2009;29:139–41.
9 Heerfordt IM, Gotfredsen DR, Horwitz H, . EudraVigilance insights: Suspected adverse drug reactions in infants through breastfeeding. Br J Clin Pharmacol 2025;91:2431–6.40190021
10 Morze K, Szałek E, Waszyk-Nowaczyk M. Minding the gap. Drug-related problems among breastfeeding women. Front Pharmacol 2025;16:1542269.40183105

## Substance Identification

### Substance Name

Topiramate

### CAS Registry Number

97240-79-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

Neuroprotective Agents